# Xanomeline

CASRN: 131986-45-3

SID: 388765364; 433990217

## Drug Levels and Effects

### Summary of Use during Lactation

Xanomeline is a cholinergic antipsychotic agent that is available in combination with trospium, which is a peripheral anticholinergic agent. No information is available on the clinical use of xanomeline or trospium during breastfeeding. Because trospium is a charged molecule, it is unlikely to pass well into milk. If the mother requires xanomeline, it is not a reason to discontinue breastfeeding. Until more data are available, the xanomeline-trospium combination should only be used with careful infant monitoring, particularly for gastrointestinal side effects such as nausea, vomiting diarrhea, and reflux.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Xanomeline

### CAS Registry Number

131986-45-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents

Parasympathomimetics

Psychotropic Drugs

Muscarinic Agonists